# Benzathine Penicillin G

CASRN: 1538-09-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates benzathine penicillin G produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Benzathine penicillin G is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Two women received one dose of 2.4 million units of benzathine penicillin G intramuscularly 20 hours after delivery. Milk concentrations decreased from 30 units/L on the third day to 10 units/L on the fifth day. After the fifth day, milk levels were undetectable. The authors estimated that an exclusively breastfed infant would receive a maximum of 6 to 7 units daily.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A breastfed 1-month-old infant with congenital syphilis developed a Herxheimer reaction 6 hours after its mother received 2.4 million units of benzathine penicillin G intramuscularly. However, the baby had also received 10 units of penicillin G at about the same time as the mother's injection. The reaction was possibly caused by penicillin in breastmilk.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Borderon E, Soutoul J, Borderon J, et al. Excretion of antibiotics in human milk. Med Mal Infect 1975;5:373-6.
2 Rollier R, Rollier M, Bellouchi M. Herxheimer's reaction in maternal milk in early congenital syphilis. Bull Soc Fr Dermatol Syphiligr 1967;74:178-80.6070262

## Substance Identification

### Substance Name

Benzathine Penicillin G

### CAS Registry Number

1538-09-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins